# Norethynodrel

CASRN: 68-23-5

## Drug Levels and Effects

### Summary of Use during Lactation

Norethynodrel is only available in the United States in combination oral contraceptive products. Based on the available evidence, expert opinion holds that progestin-only contraceptives are preferred over combined oral contraceptives in breastfeeding women, especially during the first 4 weeks postpartum.[1] For further information, consult the record entitled, Contraceptives, Oral, Combined.

### Drug Levels

Norethynodrel is a prodrug that is rapidly converted to norethindrone in the body.[2]

Maternal Levels. In one old study using a nonspecific radiolabeling assay technique, 2 women were found to excrete 0.0044% and 0.13% of an administered dose (not weight-adjusted) of norethynodrel into breastmilk.[3]

In another study using radioactive labeled norethynodrel, 4 women who were between days 4 and 6 postpartum excreted an average of 1.1% (range 0.45 to 1.52%) of a dose (not weight-adjusted) into breastmilk.[4]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Abnormal breast enlargement was reported in a 3-week-old male breastfed infant whose mother was taking an oral contraceptive containing norethynodrel 25 mg and mestranol 100 mcg.[5] The contraceptive was the probable cause of breast enlargement, but most likely the estrogen component mestranol rather than norethynodrel caused the effect.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date. However, progestins such as norethynodrel are not considered to suppress lactation.

A study analyzed data from a prospective cohort study of U.S. women from May 2005 through June 2007. Women were followed from the third trimester of pregnancy throughout the first year postpartum. Data from the subset of women who intended to breastfeed for 3 months or longer postpartum during their third trimester of pregnancy and who were using a contraceptive at 3 months postpartum were analyzed (n = 1349). Women who intended to breastfeed for at least 4 months and were taking a progestin-only oral contraceptive, such as norethynodrel, were 3.15 times more likely to be breastfeeding (exclusive or nonexclusive) at 4 months than women who used a nonhormonal contraceptive. Women who said they would breastfeed for 3 to 4 months had 4-month breastfeeding rates equivalent to those using a nonhormonal contraceptive. These rates were much higher than those of women who were taking an estrogen-containing, combined oral contraceptive.[6]

### Alternate Drugs to Consider

Etonogestrel, Intrauterine Copper Contraceptive, Oral Levonorgestrel, Intrauterine Levonorgestrel, Levonorgestrel Implant, Medroxyprogesterone Acetate, Norethindrone, Progesterone

### References

1 World Health Organization. Medical Eligibility Criteria For Contraceptive Use: Sixth Ed. 2025. https://www.who.int/publications/i/item/9789240115583
2 Orme ML, Back DJ, Breckenridge AM. Clinical pharmacokinetics of oral contraceptive steroids. Clin Pharmacokinet 1983;8:95–136.6342899
3 Pincus G, Bialy G, Layne DS, et al. Radioactivity in the milk of subjects receiving radioactive 19-norsteroids. Nature 1966;212:924–5.6012386
4 Laumas KR, Malkani PK, Bhatnagar S, et al. Radioactivity in the breast milk of lactating women after oral administration of 3H-norethynodrel. Am J Obstet Gynecol 1967;98:411–3.5630224
5 Curtis EM. Oral-contraceptive feminization of a normal male infant. Obstet Gynecol 1964;23:295–6.14117345
6 Goulding AN, Wouk K, Stuebe AM. Contraception and breastfeeding at 4 months postpartum among women intending to breastfeed. Breastfeed Med 2018;13:75–80.29091478

## Substance Identification

### Substance Name

Norethynodrel

### CAS Registry Number

68-23-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Contraceptive Agents, Female

Contraceptives, Oral, Synthetic